# Tofersen

CASRN: 2088232-70-4

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of tofersen during breastfeeding. Because small doses of tofersen are given intrathecally, amounts in the breastmilk are likely to be low. It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal. If tofersen is required by the mother, it is not a reason to discontinue breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Tofersen

### CAS Registry Number

2088232-70-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Oligonucleotides